# Terbinafine

CASRN: 91161-71-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that oral maternal doses of 500 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Monitor the infant for jaundice or other signs of liver toxicity, especially in younger, exclusively breastfed infants. Some sources recommend avoiding oral terbinafine during nursing.[1]

Topical terbinafine has not been studied during breastfeeding. Because only about 1% is absorbed after topical application, it is considered a low risk to the nursing infant.[1,2] Avoid application to the nipple area and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated. Only water-miscible cream, gel or liquid products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[3]

### Drug Levels

Maternal Levels. A review article states that 2 women excreted totals of 0.7 and 0.2 mg in their milk after a single oral dose of 500 mg of terbinafine.[4] The details of this study were obtained from the manufacturer (Sandoz). Two healthy women aged 32 and 33 years and weighing 57.9 kg and 53.1 kg, respectively, were not breastfeeding, but had some milk production. They were each given four 125 mg tablets of terbinafine after an 8-hour fast. All milk was collected at 6-hour intervals for 72 hours after the dose. The highest concentrations of terbinafine in milk occurred in the first 6-hour aliquot and were 7.3 and 7.9 mg/L, respectively. In the 6- to 12-hour sample, milk concentrations were 2.0 and 2.4 mg/L. In the 12- to 18-hour sample, milk concentrations were 0.15 and 0.25 mg/L. After 18 hours, terbinafine was undetectable (<150 mcg/L[5]) by HPLC assay in milk. The major metabolite of terbinafine was undetectable (<150 mcg/L[5]) by HPLC assay in all aliquots. The cumulative amounts in milk over the 18 hours after the dose were 0.65 mg and 0.15 mg, respectively (noted above as rounded values). Milk production over this time period was 218 mL and 41 mL, respectively.[6] Using the average milk concentration values over the 24-hour period in the 2 subjects, an exclusively breastfed infant would receive 3.8% of the maternal weight-adjusted dosage of terbinafine.

Some package inserts in the U.S. state that milk concentrations of terbinafine are 7-fold maternal plasma concentrations. Communication with the originator U.S. manufacturer, Novartis, indicates that this value was derived from an animal experiment (species not specified). This value is far higher than that found in humans and cannot be considered to be reliable.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Topical to Toenails) Ciclopirox, Efinaconazole, Tavaborole

### References

1 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651-68.38280680
2 Leachman SA, Reed BR. The use of dermatologic drugs in pregnancy and lactation. Dermatol Clin 2006;24:167-97.16677965
3 Noti A, Grob K, Biedermann M, et al. Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317-25.14623482
4 Stephen A, Czok R, Male O. Terbinafine: Initial clinical results. In: Fromtling R, ed. Recent trends in the discovery, development and evaluation of antifungal agents. Barcelona: JR Prous Science Publishers, SA; 1987:511-20.
5 Schatz F, Haberl H. Analytical methods for the determination of terbinafine and its metabolites in human plasma, milk and urine. Arzneimittelforschung 1989;39:527-32.2751743
6 Thieme G, Peuckert U. Report on a pharmacokinetic study of SF 86-327 in healthy females in the ablactation period. 1986. Sandoz document number 303-019.

## Substance Identification

### Substance Name

Terbinafine

### CAS Registry Number

91161-71-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents